# Amikacin

CASRN: 37517-28-5

## Drug Levels and Effects

### Summary of Use during Lactation

Amikacin is poorly excreted into breastmilk. Newborn infants apparently absorb small amounts of other aminoglycosides, but serum levels with typical three times daily dosages are far below those attained when treating newborn infections and systemic effects of amikacin are unlikely. Older infants would be expected to absorb even less amikacin. Because there is little variability in the milk amikacin levels during multiple daily dose regimens, timing breastfeeding with respect to the dose is of little or no benefit in reducing infant exposure. Data are not available with single daily dose regimens. Monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea, candidiasis (e.g., thrush, diaper rash) or rarely, blood in the stool indicating possible antibiotic-associated colitis.

### Drug Levels

Maternal Levels. Two women were given a single dose of 100 mg amikacin intramuscularly, and milk levels were measured at 2 and 6 hours after the dose. Only trace levels were detected. In one woman on amikacin therapy, the peak amikacin milk level was 1.5 mg/L 2.5 hours after a 100 mg dose by injection.[1]

Two women were given a single 200 mg dose of amikacin intramuscularly and milk levels were measured hourly for 6 hours. They had only trace levels in milk 6 hours after the dose.[2]

A woman given a single dose of amikacin 100 mg intramuscularly had undetectable milk amikacin levels 1 and 2 hours after the dose and only trace amounts in milk at 4 and 6 hours after the dose.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Matsuda S, Mori S, Tanno M, Kashiwagura T. [Evaluation of amikacin in obstetric and gynecological fields]. Jpn J Antibiot 1974;27:633-6.4617009
2 Yuasa M. Evaluation of amikacin in gynecological and obstetric field. Jpn J Antibiot 1974;27:377-81.4612187
3 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732

## Substance Identification

### Substance Name

Amikacin

### CAS Registry Number

37517-28-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibacterial Agents

Anti-infective Agents

Aminoglycosides